# Nifedipine

CASRN: 21829-25-4

## Drug Levels and Effects

### Summary of Use during Lactation

Because of the low levels of nifedipine in breastmilk, amounts ingested by the infant are small, even in women with a genetic variant of breast cancer resistance protein that increases the amount of drug transferred to milk. No adverse effects have been reported among infants exposed to nifedipine in breastmilk. Nifedipine is used to treat painful nipple vasospasm (e.g., Raynaud phenomenon) in nursing mothers who do not respond to other measures such as hot compresses and avoidance of cold exposure.[1-6] The dosages of nifedipine most commonly reportedly used to treat the condition is 20 to 60 mg daily either as a single dose of a sustained-release product or 10 to 20 mg 3 times daily of an immediate-release product. Lower dosages can be tried if these doses are not tolerated.

### Drug Levels

Maternal Levels. A woman taking nifedipine 10 mg four times daily was given a 20 mg test dose 10 days postpartum. One hour after this dose, peak milk levels of the drug and its pyridine metabolite were 43 and 15 mcg/L, respectively. By 4 hours after the dose, the levels of both drugs in breastmilk were less than 5 mcg/L.[7]

Another woman took doses of 10, 20 and 30 mg every 8 hours on different days shortly after delivering a premature infant. Her peak milk nifedipine levels occurred 1 hour after each dose. The half-life of the drug in milk varied with dosage: 1.4 hours with the 10 mg dose; 3.1 hours with the 20 mg dose; and 2.4 hours with the 30 mg dose. The average milk half-life of all doses was 3.3 hours. The highest milk level found was 53 mcg/L at 30 minutes after the 30 mg dose. Nifedipine had fallen to undetectable levels (<2 mcg/L) by 5.25 hours after the 10 mg dose. At 8 hours after the dose, nifedipine concentrations in milk were 3.2 mcg/L with the 20 mg dose and 4.9 mcg/L with the 30 mg dose. The total amounts in milk collected over 24 hours were 0.12 mcg with 10 mg every 8 hours, an average of 1.07 mcg with 20 mg every 8 hours, and an average of 1.71 mcg with 30 mg every 8 hours. Using the peak milk level data from the 30 mg every 8 hour dosage in this study, the authors estimated that an exclusively breastfed infant would receive an estimated maximum of 7.5 mcg/kg daily with this maternal dosage regimen.[8]

In 6 women taking a dose of 10 mg three times daily, milk levels ranged from <1 to 10.3 mcg/L at random times between 1 and 8 hours after a dose, with a median of 3.5 mcg/L.[9]

In a study of 21 women taking a median dosage of 40 mg daily, mostly as a sustained-release product, 13 donated milk samples at a median of 7 days postpartum (range 1 to 100 days). The infants would receive an average daily dosage of 0.1% of their mother's weight-adjusted dosage in breast milk.[10]

Nineteen hypertensive nursing mothers taking 20 mg of slow-release nifedipine daily for at least 15 days postpartum were genotyped for breast cancer resistance protein. Trough milk samples were obtained between 15 and 30 days postpartum. Women with the wild type homozygous ABCG2 421CA variant had median breastmilk nifedipine levels about 3 times higher (29 mcg/L) than those with the wild, homozygous ABCG2 421CC variant (10.5 mcg/L). However, the difference was not statistically significant (p =0.0793). The median milk to plasma ratio was significantly higher in those with ABCG2 421CA (about 1.2) than in those with ABCG2 421CC (0.73).[11]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

No adverse reactions have been reported among infants exposed to nifedipine in breastmilk mostly at maternal dosages of 30 mg daily beginning shortly postpartum and continuing for up to 6 months in some.[2,7,12-18]

### Effects on Lactation and Breastmilk

No direct effects are known. However, nifedipine has been used to decrease the pain of nipple vasospasm (or Raynaud phenomenon of the nipple), allowing mothers to continue nursing who might otherwise discontinue breastfeeding.[1,2,4,13-16,18-21]

Nifedipine had no effect on milk composition (sodium, potassium, calcium, chloride, nitrogen, phosphorus and total lipids) in one woman.[8]

In a pilot study of the treatment of patients with postpartum hypertension, patients were randomized to either 12.5 mg hydrochlorothiazide plus 10 mg of lisinopril (n = 31) or 30 mg of nifedipine (n = 36) daily. The dosages could be increased to 12.5 mg hydrochlorothiazide plus 20 mg of lisinopril and then to 25 mg hydrochlorothiazide with 20 mg lisinopril. Nifedipine dosage was increased in 30 mg increments to a maximum daily dose of 120 mg daily. At discharge, 21 hydrochlorothiazide-lisinopril mothers (70%) were breastfeeding while19 nifedipine mothers (53%) were breastfeeding.[22]

### Alternate Drugs to Consider

Amlodipine, Nitrendipine

### References

1 Berens P, Eglash A, Malloy M, et al. ABM Clinical Protocol #26: Persistent pain with breastfeeding. Breastfeed Med 2016;11:46–53.26881962
2 Anderson PO. Drug treatment of Raynaud's phenomenon of the nipple. Breastfeed Med 2020;15:686–8.32700966
3 Deniz S, Kural B. Nipple vasospasm of nursing mothers. Breastfeed Med 2023;18:494–8.37335330
4 Eymann A, Pontoriero Daroni J, Brinci M, et al. Raynaud's phenomenon of the nipple during breastfeeding: A case series. Arch Argent Pediatr 2024;122:e202310280.38771559
5 Moreira TG, Castro GM, Gonçalves Júnior J. Raynaud's phenomenon of the nipple: Epidemiological, clinical, pathophysiological, and therapeutic characterization. Int J Environ Res Public Health 2024;21 39857474
6 Trebbin J, Singh TA. Raynaud's phenomenon of the nipple: A case report of postpartum recurrence and treatment. J Midwifery Womens Health 2025;70:807–11.40958138
7 Penny WJ, Lewis MJ. Nifedipine is excreted in human milk. Eur J Clin Pharmacol 1989;36:427–8.2737237
8 Ehrenkranz RA, Ackerman BA, Hulse JD. Nifedipine transfer into human milk. J Pediatr 1989;114:478–80.2921695
9 Manninen AK, Juhakoski A. Nifedipine concentrations in maternal and umbilical serum, amniotic fluid, breast milk and urine of mothers and offspring. Int J Clin Pharmacol Res 1991;11:231–6.1814844
10 Taddio A, Oskamp M, Ito S, et al. Is nifedipine use during labour and breast-feeding safe for the neonate? Clin Investig Med 1996;19:S11.
11 Malfará BN, Benzi JRL, de Oliveira Filgueira GC, et al. ABCG2 c.421C>A polymorphism alters nifedipine transport to breast milk in hypertensive breastfeeding women. Reprod Toxicol 2019;85:1–5.30659932
12 Lawlor-Smith LS, Lawlor-Smith CL. Raynaud's phenomenon of the nipple: A preventable cause of breastfeeding failure? Med J Aust 1996;166:448.9140358
13 Garrison CP. Nipple vasospasm, Raynaud's syndrome, and nifedipine. J Hum Lact 2002;18:382–5.12449056
14 Anderson JE, Held N, Wright K. Raynaud's phenomenon of the nipple: A treatable cause of painful breastfeeding. Pediatrics 2004;113:e360–4.15060268
15 Page SM, McKenna DS. Vasospasm of the nipple presenting as painful lactation. Obstet Gynecol 2006;108 (3 Part 2):806–8.17018510
16 O'Sullivan S, Keith MP. Raynaud phenomenon of the nipple: A rare finding in rheumatology clinic. J Clin Rheumatol 2011;17:371–2.21946463
17 Wu M, Chason R, Wong M. Raynaud's phenomenon of the nipple. Obstet Gynecol 2012;119 (2 Pt 2):447–9.22270434
18 Barrett ME, Heller MM, Fullerton Stone, H, et al. Raynaud phenomenon of the nipple in breastfeeding mothers: An underdiagnosed cause of nipple pain. JAMA Dermatol 2013;149:300–6.23682366
19 Gallego H, Aleshaki JS. Raynaud phenomenon of the nipple successfully treated with nifedipine and gabapentin. Cutis 2020;105:E22–E3.32717000
20 Jansen S, Sampene K. Raynaud phenomenon of the nipple: An under-recognized condition. Obstet Gynecol 2019;133:975–7.30969221
21 Quental C, Brito DB, Sobral J, et al. Raynaud phenomenon of the nipple: A clinical case report. J Family Reprod Health 2023;17:113–5.37547779
22 Fishel Bartal M, Blackwell SC, Pedroza C, et al. Oral combined hydrochlorothiazide and lisinopril vs nifedipine for postpartum hypertension: a comparative-effectiveness pilot randomized controlled trial. Am J Obstet Gynecol 2023;228:571.e1–.e10.

## Substance Identification

### Substance Name

Nifedipine

### CAS Registry Number

21829-25-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Calcium Channel Blockers

Vasodilator Agents